# Phototherapy

## Drug Levels and Effects

### Summary of Use during Lactation

Laser therapy and phototherapy are considered acceptable during breastfeeding.[1,2] Phototherapy for psoriasis is also generally acceptable; however, nursing should be withheld for 24 hours after ingestion of an oral psoralen, such as methoxsalen.[2-4] Laser therapy was used in some Russian and Austrian studies to prevent and treat lactation mastitis and nipple fissures.[5-9] However, these studies are rather old and not well controlled. A more recent, well-controlled trial found that laser treatment of the nipples resulted in greater nipple pain relief than sham therapy.[10] Meta-analysis of 7 more recent studies found that diode laser light at various frequencies was effective in reducing pain in nipple trauma, defined as fissures, excoriations, cracks, abrasions, or erosions.[11] Some small studies have found that application of laser light to the breasts increases serum prolactin and milk production. Laser application to cesarean section wounds did not adversely affect serum prolactin.[12] A study from China indicated that high-intensity red light (630 nM) plus antibiotics were more effective than antibiotics alone in healing mastitis and preventing recurrence.[13] Laser light has also been used as part of a 5-step procedure to treat mastitis.[14]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Use of low-level laser therapy to enhance healing of the surgical incision following cesarean section was evaluated in a small, poorly controlled study. Laser light was applied for 15 minutes on 3 consecutive days postoperatively. On the third day, serum prolactin levels were not significantly different in the two groups. The treatment appeared to help wound healing.[12]

A small, randomized study compared primiparous mothers who were supplementing their infants with formula during the first month postpartum and who received either 12 sessions of low-level laser light to the breasts over 3 weeks (n = 20) or no treatment (n = 20). All mothers received similar counseling by a blinded physician certified in lactation counseling. The treated group had greater increases in serum prolactin, and breastmilk lactose, protein and fat at 3 weeks and 3 months after the start of therapy.[15]

A randomized study of women (n = 20 in each group) who were mixed feeding their infants in the first month postpartum compared 12 sessions of electroacupuncture or low-level laser therapy to the breast over 1 month and control women. All women also received oral domperidone 10 mg three times daily. Laser therapy increased serum prolactin, infant weight and maternal perception of milk production more than domperidone alone, but less than electroacupuncture.[16]

A controlled study in Egypt in breastfeeding women with nipple pain and fissures at 1 to2 weeks after delivery compared photobiomodulation to a topical cream. Photobiomodulation consisted of 12 sessions of low-level laser treatment, and the topical cream contained tocopherol, panthenol, almond oil, paraffin oil, petrolatum, and olive oil applied after each feed. The group that received the photobiomodulation had lower values on the visual analogue pain scale and greater infant weight gain at the second, third and fourth week of therapy.[17]

### References

1 Lee KC, Korgavkar K, Dufresne RG, Jr, et al. Safety of cosmetic dermatologic procedures during pregnancy. Dermatol Surg 2013;39:1573–86.24164677
2 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651–68.38280680
3 Menter A, Korman NJ, Elmets CA, et al. Guidelines of care for the management of psoriasis and psoriatic arthritis: Section 5. Guidelines of care for the treatment of psoriasis with phototherapy and photochemotherapy. J Am Acad Dermatol 2010;62:114–35.19811850
4 Moore H, Stevenson A. Breast and nipple dermatoses during lactation. Australas J Dermatol 2025;66:e386–e407.40817612
5 Dotsenko AP, Chinchenko EI, Khodos VA. Use of carbon dioxide laser in the treatment of acute lactation mastitis. Sov Med 1989;(9):39–42.2513650
6 Kovalev MI. Prevention of lactation mastitis by the use of low-intensity laser irradiation. Akush Ginekol (Mosk) 1990;(2):57–61.2339766
7 Skobelkin OK, Brekhov EI, Chegin VM, et al. The carbon dioxide laser in the complex treatment of acute suppurative lactation mastitis. Vestn Khir Im I I Grek 1984;132:67–9.6424314
8 Skobelkin OK, Derbenev VA, Velikii PIa, et al. Use of lasers in the treatment of acute suppurative lactation mastitis. Vestn Khir Im I I Grek 1988;141:46–9.3149064
9 Pietschnig B, Pani M, Kafer A, et al. Use of soft laser in the therapy of sore nipples in breastfeeding women. Adv Exp Med Biol 2000;478:437–8.11065120
10 Gaitero MV, Mira TA, Gondim EJ, et al. Low-level laser therapy for breastfeeding women with nipple pain in the early postpartum period: a randomized controlled trial. J Matern Fetal Neonatal Med 2026;39:2636360.41740971
11 de Oliveira Alves R, Faccioli Ragghianti MH, Nunes LP, et al. Photobiomodulation as a promising approach in the management of nipple lesions during breastfeeding: A systematic review and meta-analysis of randomized clinical trials. Lasers Med Sci 2025;40:276.40500396
12 Mokmeli S, Khazemikho N, Niromanesh S, et al. The application of low-level laser therapy after cesarean section does not compromise blood prolactin levels and lactation status. Photomed Laser Surg 2009;27:509–12.19405857
13 Miao M, Fan CN, Liu N, et al. Clinical application research on the use of carnation photon therapeutic apparatus in treatment for acute postpartum mastitis. Proc 2016 Int Conf Biol Sci Technol 2016:154–7.
14 Yao Y, Long T, Pan Y, et al. A 5-step systematic therapy (FSST) for treating plugged ducts and mastitis in breastfeeding women: A case control study. Asian Nurs Res (Korean Soc Nurs Sci) 2021;15:197–202.34048977
15 El Taweel A, Yousef A, Hasanin M, et al. Effect of low level laser therapy of the breasts on milk production and composition in supplement dependent mothers. Breastfeed Med 2017;12 (Suppl 1):S13. doi:10.1089/bfm.2017.29058.abstracts
16 Maged AM, Hassanin ME, Kamal WM, et al. Effect of low-level laser therapy versus electroacupuncture on postnatal scanty milk secretion: A randomized controlled trial. Am J Perinatol 2020;37:1243–9.31327162
17 Elseody MHAA, Mohamed MAE, Alsharnoubi J. Could photobiomodulation help lactating women and their newborns? Lasers Med Sci 2024;39:192.39046567

## Substance Identification

### Substance Name

Phototherapy

### Drug Class

Breast Feeding

Lactation

Milk, Human

Laser Therapy

Low-Level Light Therapy

PUVA Therapy